# Vanzacaftor, Tezacaftor and Deutivacaftor

CASRN: 2374124-49-7; 1152311-62-0; 1413431-07-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on milk or infant serum levels of vanzacaftor or deutivacaftor. Information from mother-infant pairs with elexacaftor, ivacaftor and tezacaftor indicates that tezacaftor has low levels in milk and infant serum. Deutivacaftor is a deuterated form of ivacaftor that has slower clearance, a longer half-life and greater maternal exposure. An international survey of cystic fibrosis (CF) centers found no adverse effects in breastfed infants of mothers taking these drugs and a task force respiratory experts from Europe, Australia and New Zealand found that these drugs are probably safe during breastfeeding.[1] Infants exposed to CFTR modulators through breastmilk should have periodic liver function testing and an examination by an ophthalmologist for cataracts. Because CFTR modulators can mask cystic fibrosis in breastfed infants, testing of breastfed infants for CF should be performed. Detailed monitoring recommendations have been published.[2]

### Drug Levels

Deutivacaftor is a deuterated form of ivacaftor that has slower clearance and a longer half-life.[3] At recommend adult dosages, exposure to deutivacaftor is about 67% greater than with usual dosages of ivacaftor in a similar 3-drug combination product. Milk levels of deutivacaftor are probably increased by about the same amount, but no studies on milk excretion of deutivacaftor or on vanzacaftor have been reported. Information on ivacaftor can be found in the ivacaftor record and tezacaftor information is reported below.

Maternal Levels. Two nursing mothers with cystic fibrosis who were taking elexacaftor, ivacaftor and tezacaftor, had their milk samples analyzed 2 or 3 times between 15 and 60 days postpartum. The tezacaftor milk level was <1 micromolar in one woman at 15 and 60 days postpartum. The other woman had a tezacaftor milk level of <1 micromolar at 30 and 45 days postpartum. Milk levels tended to increase slightly over time.[4]

Two nursing mothers with cystic fibrosis were taking elexacaftor, ivacaftor and tezacaftor in unspecified dosages. The tezacaftor concentration in milk at unreported times after a dose was 0.12 micromolar (62.5 mcg/L) and 0.39 micromolar (203 mcg/L).[5]

A woman with cystic fibrosis received elexacaftor 100 mg, tezacaftor, 50 mg, ivacaftor 75 mg and additional ivacaftor 150 mg daily while exclusively breastfeeding her 3-month-old infant. Fasting breastmilk samples were collected just before the morning dose of elexacaftor, tezacaftor, and ivacaftor. The tezacaftor concentration in milk was 761 mcg/L.[6]

Infant Levels. Two partially breastfed (extent not stated) infants whose mothers were taking elexacaftor, ivacaftor and tezacaftor had serum drug concentrations measured several times. Tezacaftor levels were highest of the 3 drugs, starting at about 1 micromolar at birth. Levels remained similar in one infant up to 100 days of age and dropped below 1 micromolar at 45 and 60 days postpartum in the other.[4]

A woman with cystic fibrosis received elexacaftor 100 mg, tezacaftor, 50 mg, ivacaftor 75 mg and additional ivacaftor 150 mg daily while exclusively breastfeeding her 3-month-old infant. An infant blood sample was collected before the morning dose of the combination. The infant was not breastfed 2 hours prior to blood collection. The infant’s plasma tezacaftor concentration was 13.9 mcg/L.[6]

A woman was taking elexacaftor 100 mg, tezacaftor, 50 mg, ivacaftor 75 mg and additional ivacaftor 150 mg daily. Drug levels were measured in her breastfed infant on day 15 of life. The infant’s serum concentration of tezacaftor was 0.92 mg/L.[7]

### Effects in Breastfed Infants

Relevant published information on the combination of vanzacaftor, tezacaftor and deutivacaftor was not found as of the revision date. Information on other partially overlapping combination products is listed below.

An infant was born to a mother taking elexacaftor, ivacaftor and tezacaftor for cystic fibrosis. The infant was breastfed (extent not stated). Although the infant had cystic fibrosis-causing CFTR mutations, the infant was healthy and tested negative for cystic fibrosis on newborn screening. The authors expressed concern that the drugs received transplacentally and in breastmilk caused a false negative screening test.[8]

A mother who was a heterozygous carrier of the F508del gene became pregnant with a homozygous infant. At 32 weeks of pregnancy, the mother began elexacaftor, ivacaftor and tezacaftor in the usual adult dosage to treat her fetus who had evidence of meconium ileus. The infant was born at 36 weeks and given pancreatic enzyme replacement therapy with breastfeeding while maternal treatment continued. The infant’s fecal elastase, transaminases and bilirubin were normal at about 1 month of age. The infant’s sweat chloride, although low, was nearer to normal than was expected. The authors hypothesized that the medications received in breastmilk moderated the disease process in the infant.[9]

Three women with cystic fibrosis were taking elexacaftor, ivacaftor and tezacaftor in unspecified dosages during pregnancy and postpartum while breastfeeding. On routine visual examinations between 8 days and 6 months postpartum, their infants were found to have small ( < 1.0 mm) bilateral cataracts, in the central area in one and outside the visual axis in the other two. Breastfeeding was discontinued after diagnosis at 16 days, 9 weeks and 6 months postpartum. The contribution of breastfeeding to the cataracts could not be determined.[5]

A woman with cystic fibrosis began elexacaftor, ivacaftor and tezacaftor prior to conception and continued it throughout pregnancy. She partially breastfed (extent not stated) her infant. The infant had slowly increasing ALT values through 90 days of age, peaking at 65 units/L (upper limit of normal 30 units/L). Liver ultrasound and ophthalmologic exams were normal. Evaluation by a pediatric gastroenterologist did not identify a cause of increased ALT other than exposure to the drug combination. Levels normalized by age 158 days.[4]

Two women were reported by the British Columbia cystic fibrosis clinic who became pregnant and breastfed their infants. One took ivacaftor and breastfed (extent not stated) for 42 months. Her infant was physically normal and healthy, but had speech delay. The other woman took Tricafta (ivacaftor, elexacaftor, and tezacaftor). She breastfed (extent not stated) her infant for 6 months and her infant had no complications.[10]

A woman with cystic fibrosis took ivacaftor 150 mg, tezacaftor 100 mg and elexacaftor 200 mg in the morning and ivacaftor 150 mg at night during pregnancy and breastfeeding (extent not stated). The infant had not regained his birthweight at 10 days postpartum, his stools had a greasy rim, and he had pancreatic elastase levels below levels for pancreatic sufficiency but higher than expected for newborns homozygous for this mutation. The infant started on pancreatic enzymes and by day 20, he had normal elastase levels. By day 45 of life was gaining weight and stools were normal. At 6 months of age the infant was still being breastfed and doing well. The authors felt that when breastfeeding is stopped, a rebound in symptoms might occur because the infant will no longer be receiving small amounts of the mother’s medications through milk.[11]

A woman with cystic fibrosis received elexacaftor 100 mg, tezacaftor, 50 mg, ivacaftor 75 mg and additional ivacaftor 150 mg daily from 12 weeks of pregnancy and postpartum. The mother exclusively breastfed her infant while continuing therapy, and no significant side a pharmacovigilance effects related were observed in the infant up to at least 3 months of age.[6]

A pharmacovigilance center in France reported 2-fold or less liver enzyme elevations in 3 exclusively breastfed infants whose mothers were taking elexacaftor 200 mg, tezacaftor, 100 mg, ivacaftor 150 mg in the morning and additional ivacaftor 150 mg daily; two infants also had concurrent bilirubin elevation. The abnormalities had an onset ranging from days 4 to 90 postpartum. In one case, exclusive breastfeeding continued for up to 6 months with resolution of liver enzymes abnormalities beginning at about 6 months. In the second case, exclusive breastfeeding continued throughout the follow-up with spontaneous regression of liver enzyme disorders. In the third case, breastfeeding was stopped at day 9 with resolution of the elevated enzyme levels. The ophthalmological examination carried out at 1 and 6 months in the first two infants found no cataracts.[7]

Two breastfed infants whose mothers were taking elexacaftor, ivacaftor and tezacaftor developed mild liver enzyme elevations. In one mild, stable AST elevations were seen at 4 and 6 months of age (48 and 49 IU/L, respectively; normal: 15 to 41 IU/L) but all other parameters were normal. In the second, ALT (124 IU/L; normal: 10 to 35 IU/L), AST (94 IU/L, normal: 10 to 35 IU/L), and bilirubin (25 micromoles/L; normal: 0 to 20 micromoles/L) were seen at 3 months of age. At 4 months of age liver enzymes were still elevated but had improved slightly, with bilirubin in normal range (ALT 108 IU/L, AST 87 IU/L, bilirubin 15 micromoles/L). Enzyme levels continued to improve at month 6 (ALT 48 IU/L, AST 68 IU/L, bilirubin 5 micromoles/L) and at month 9 (ALT 25 IU/L, AST 53 IU/L, bilirubin 4 micromoles/L) with continued breastfeeding. The extent of breastfeeding was not stated for either infant.[12]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Middleton PG, Gade EJ, Aguilera C, . ERS/TSANZ Task Force Statement on the management of reproduction and pregnancy in women with airways diseases. Eur Respir J 2020;55:1901208.31699837
2 Bokobza I, Kazmerski TM, Thomson L, . International Delphi consensus recommendations for the follow-up of children born to people with CF and exposed to CFTR modulators in utero or through breastfeeding; endorsed by the European Cystic Fibrosis Society. J Cyst Fibros 2026;25:600-8.42049593
3 Harbeson SL, Morgan AJ, Liu JF, . Altering metabolic profiles of drugs by precision deuteration 2: Discovery of a deuterated analog of ivacaftor with differentiated pharmacokinetics for clinical development. J Pharmacol Exp Ther 2017;362:359-67.28611092
4 Collins B, Fortner C, Cotey A, . Drug exposure to infants born to mothers taking elexacaftor, tezacaftor, and ivacaftor. J Cyst Fibros 2022;21:725-7.34952795
5 Jain R, Wolf A, Molad M, . Congenital bilateral cataracts in newborns exposed to elexacaftor-tezacaftor-ivacaftor in utero and while breast feeding. J Cyst Fibros 2022;21:1074-6.36266182
6 Ripani P, Mucci M, Pantano S, . Maternal, newborn and breast milk concentrations of elexacaftor/tezacaftor/ivacaftor in a F508del heterozygous woman with cystic fibrosis following successful pregnancy. Front Med (Lausanne) 2023;10:1274303.38131041
7 Bergeron S, Audousset C, Bourdon G, . Elexacaftor/tezacaftor/ivacaftor induced liver enzymes abnormalities in breastfed infants: A series of 3 cases. Therapie 2025;80:341-3.39306488
8 Fortner CN, Seguin JM, Kay DM. Normal pancreatic function and false-negative CF newborn screen in a child born to a mother taking CFTR modulator therapy during pregnancy. J Cyst Fibros 2021;20:835-6.33846105
9 Szentpetery S, Foil K, Hendrix S, . A case report of CFTR modulator administration via carrier mother to treat meconium ileus in a F508del homozygous fetus. J Cyst Fibros 2022;21:721-4.35422395
10 Goodwin J, Quon BS, Wilcox PG. Experience to date with CFTR modulators during pregnancy and breastfeeding in the British Columbia Cystic Fibrosis clinic. Respir Med Case Rep 2022;40:101778.36386290
11 Gómez-Montes E, Salcedo Lobato E, Galindo Izquierdo A, . Prenatal cystic fibrosis transmembrane conductance regulator modulator therapy: A promising way to change the impact of cystic fibrosis. Fetal Diagn Ther 2023;50:136-42.36996799
12 Kolaczkowski TJ, Bevan A, Legg J, . Elevated liver function tests in infants exposed to elexacaftor-tezacaftor-ivacaftor in utero and while breastfeeding - Case reports. J Cyst Fibros 2025;24:16-8.39424519

## Substance Identification

### Substance Name

Vanzacaftor, Tezacaftor and Deutivacaftor

### CAS Registry Number

2374124-49-7; 1152311-62-0; 1413431-07-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Chloride Channel Agonists

Cystic Fibrosis Transmembrane Conductance Regulator Protein Modulator

CFTR Protein Modulator